# Indium In 111 White Blood Cells

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of indium In 111 white blood cells (In 111 leukocytes) as a diagnostic agent. Breastfeeding should be interrupted temporarily after administration of high doses of In 111 leukocytes to a nursing mother. British authorities state that doses greater than 10 MBq should not be administered to breastfeeding patients, and at that doses there and below, no interruption of breastfeeding is required.[1] US recommendations state that a period of 6 days of interruption of breastfeeding is recommended, irrespective of dose.[2] During the period of interruption, the breasts should be emptied regularly and completely. If the mother has expressed and saved milk prior to the examination, she can feed it to the infant during the period of nursing interruption.[1,3] The milk that is pumped by the mother during the time of breastfeeding interruption can either be discarded or stored frozen and given to the infant after 10 physical half-lives, or about 28 days, have elapsed. After doses greater than 10 MBq, consideration of temporarily limiting close contact between the mother and infant.[1]

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[4]

### Drug Levels

Indium 111 decays by electron capture with 173 keV and 245 keV gamma emissions and a physical half-life of 2.8 days.[2] The maximum effective half-life of In 111 white blood cells is 130 hours.[1]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 ARSAC notes for guidance: Good clinical practice in nuclear medicine. Notes for guidance on the clinical administration of radiopharmaceuticals and use of sealed radioactive sources. 2020. https://www.gov.uk/government/publications/arsac-notes-for-guidance
2 Dilsizian V, Metter D, Palestro C, et al. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf
3 Mountford PJ, Coakley AJ. A review of the secretion of radioactivity in human breast milk: Data, quantitative analysis and recommendations. Nucl Med Commun 1989;10:15-27.2645546
4 Stabin MG, Breitz HB. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203

## Substance Identification

### Substance Name

Indium In 111 White Blood Cells

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Indium Radioisotopes

Diagnostic Agents